# Casirivimab

CASRN: 2415933-42-3

## Drug Levels and Effects

### Summary of Use during Lactation

The distribution of casirivimab and imdevimab was stopped in the US in January of 2022 because of a lack of efficacy against COVID-19 variants. Because casirivimab is a large protein molecule, the amount in milk is likely to be very low.[1] It is also likely to be partially destroyed in the infant's gastrointestinal tract and absorption by the infant is probably minimal.[2] Casirivimab is a monoclonal antibody given together with imdevimab. Both are directed against the SARS-CoV-2 virus that causes COVID-19. Casirivimab and imdevimab transiently increased anti-receptor-binding domain IgG titers in one woman.

### Drug Levels

Maternal Levels. Maternal Levels. A nursing mother received the Pfizer-BioNTech COVID-19 vaccine about 1.8 months postpartum followed by the second dose in the primary series. From 60 day postpartum, she had a poor IgG antibody response against the receptor binding domain to the vaccine compared to a matched control woman. At day 216 postpartum, she tested positive for SARS-CoV-2 and on day 222, she received an intravenous infusion of casirivimab 600 mg and imdevimab 600 mg. Her milk anti-receptor-binding domain IgG titers increased markedly before returning to her baseline at about 560 days postpartum.[3]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

An unvaccinated Japanese woman who was 36 weeks and 6 days pregnant developed COVID-19 and was given an intravenous dose of casirivimab and imdevimab (Ronapreve) for her COVID-19 infection. Her infant was born 5 days later and separated from her. Approximately 10 days after the dose, she began breastfeeding her infant. At 30 days of age, the infant was in good health.[4]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Nirmatrelvir, Remdesevir

### References

1 Stratigakis A, Paty D, Zou P, et al. A regression approach for assessing large molecular drug concentration in breast milk. Reprod Breed 2023;3:199-207. doi:10.1016/j.repbre.2023.10.003
2 Anderson PO. Monoclonal antibodies during breastfeeding. Breastfeed Med 2021;16:591-3.33956488
3 Marshall NE, Blanton MB, Doratt BM, et al. Monoclonal antibody therapy of breastfeeding patient infected with SARS-CoV-2: A case report. Breastfeed Med 2023;18:626-30.37615569
4 Ogawa E, Goto H, Ushimaru H, et al. Vaginal delivery after improvement in COVID-19 by monoclonal antibody treatment: A case report and literature review. J Infect Chemother 2022;28:982-6.35288022

## Substance Identification

### Substance Name

Casirivimab

### CAS Registry Number

2415933-42-3

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antibodies, Monoclonal

Antibodies, Viral

Antiviral Agents